# Palifermin

CASRN: 162394-19-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of palifermin during breastfeeding. Because palifermin is a large protein molecule with a molecular weight of 16,300 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. With an average half-life of 4.5 hours, the drug should be eliminated by the mother in 2 days. Because it is administered with potent chemotherapy agents, the persistence of those drugs is probably more relevant. The manufacturer recommends that breastfeeding should be discontinued during treatment with palifermin and for at least 2 weeks after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Palifermin

### CAS Registry Number

162394-19-6

### Drug Class

Breast Feeding

Lactation

Fibroblast Growth Factors